# Lumateperone

CASRN: 313368-91-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lumateperone during breastfeeding. However, amounts of lumateperone and its metabolites in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. If lumateperone is required by the mother, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. The manufacturer reports a lactation study in 17 lactating women that evaluated the concentrations of lumateperone and its metabolites in plasma and mature breast milk following a single dose of 42 mg of lumateperone. The estimated daily infant dose of lumateperone in human milk was 0.0004 mg/kg (with assumed average daily milk consumption of 200 mL/kg). The mean relative infant dose (with an assumed mean daily milk consumption of 200 mL/kg and average maternal weight of 71 kg) was 0.06% of the maternal weight-adjusted dosage. Several major circulating metabolites were also present in breastmilk at estimated daily infant dose of 0.0004 mg/kg. Aniline metabolites were not detectable in milk or maternal plasma at quantifiable levels.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Antipsychotic) Haloperidol, Olanzapine, Risperidone, Quetiapine (Bipolar Disorder) Divalproex, Lithium, Olanzapine, Quetiapine, Risperidone, Valproic Acid

## Substance Identification

### Substance Name

Lumateperone

### CAS Registry Number

313368-91-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents